# Teduglutide

CASRN: 197922-42-2

## Drug Levels and Effects

### Summary of Use during Lactation

Because it is a large protein molecule with a molecular weight of 3752 Da, the amount in milk is likely to be very low. Teduglutide is also poorly absorbed orally so absorption by a breastfed infant is unlikely. Two breastfed infants apparently experienced no adverse effects during maternal use of teduglutide, but no long-term data are available. Until more data are available, teduglutide should be used with careful infant monitoring during breastfeeding.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

One mother used teduglutide during pregnancy and postpartum while breastfeeding. She breastfed her infant (extent not stated) for 6 months. No mention was made of any adverse effects in the infant.[1]

A woman taking teduglutide 0.05 mg/kg daily because of removal of a portion of her gastrointestinal tract became pregnant and delivered her second healthy infant. She breastfed her infant from birth and the drug was restarted 1 month after delivery. She breastfed (extent not stated) her infant for another 4 months during treatment. The infant experienced no side effects during breastfeeding.[2]

### Effects on Lactation and Breastmilk

A woman taking teduglutide 0.05 mg/kg daily because of removal of a portion of her gastrointestinal tract became pregnant and delivered her second healthy infant. She breastfed her infant from birth and the drug was restarted 1 month after delivery. She breastfed (extent not stated) her infant for another 4 months during treatment. Her milk production was reported to be good.[2]

### References

1 Gentilini MV, Doeyo M, Ortega M, . Successful pregnancy in a patient with short bowel syndrome after surgical rehabilitation and sGLP-2 treatment: Novel report on endogenous GLP-2 levels at delivery and during breastfeeding. Therap Adv Gastroenterol 2022;15:17562848221129787.
2 Lillienau J, Nilsson E, Vulcan A, . Teduglutide treatment during breast feeding in a patient with intestinal failure: A case report. Front Nutr 2025;12:1567908.40771220

## Substance Identification

### Substance Name

Teduglutide

### CAS Registry Number

197922-42-2

### Drug Class

Breast Feeding

Lactation

Milk, Human

Incretins

Glucagon-Like Peptide-1 Agonists

GLP-1 Agonists